# Propoxyphene

CASRN: 469-62-5

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Newborn infants seem to be particularly sensitive to the effects of even small dosages of propoxyphene may be particularly prone to causing these effects. Propoxyphene should be avoided during breastfeeding.

### Drug Levels

Propoxyphene is metabolized to active norpropoxyphene (25%) and to several inactive metabolites. Norpropoxyphene has a 30 to 36 hour half-life. The oral bioavailability of norpropoxyphene is unknown. Propoxyphene is available in 2 salt forms: 65 mg of the hydrochloride form is equivalent to 100 mg of the napsylate.

Maternal Levels. Six breastfeeding mothers, 5 in the first few days postcesarean section and 1 at 10 months postpartum were given oral propoxyphene hydrochloride 130 mg once then 65 mg every 4 hours for 16 hours for a cumulative dose of 390 mg. Breastmilk propoxyphene was measured at 1, 3, 5, 7, and 9 hours after the last dose. Propoxyphene peak levels occurred at 3 hours while norpropoxyphene levels remained fairly constant. An average propoxyphene and norpropoxyphene milk level over the 8-hour collection period was calculated for each patient and varied substantially among patients (range 24 to 210 mcg/L for propoxyphene and 54 to 606 mcg/L for norpropoxyphene). Norpropoxyphene had a longer maternal plasma half-life and thus accumulated in breastmilk more than propoxyphene. Greater breastmilk production was associated with higher milk levels of both propoxyphene and norpropoxyphene.[1,2] Using the highest average milk propoxyphene level in this study, an exclusively breastfed infant would receive 32 mcg/kg daily of propoxyphene and 91 mcg/kg daily of norpropoxyphene, equivalent to about 2% of the maternal weight-adjusted dosage.

Infant Levels. An infant's mother had been prescribed 6 capsules daily of propoxyphene 30 mg plus acetaminophen 500 mg for the first 10 days postpartum. The infant showed signs of toxicity, so on day 13, an infant hair sample was obtained. It contained propoxyphene 330 pg/mg and norpropoxyphene 430 pg/mg. The authors estimated that these values corresponded to serum concentrations of 42 mcg/L of propoxyphene and 462 mcg/L or norpropoxyphene.[3]

### Effects in Breastfed Infants

In a case-control study of 12 breastfed term newborns with unexplained episodes of apnea, bradycardia or cyanosis during the first week of life, maternal oral propoxyphene use was determined to be the probable cause. A higher proportion of newborns with episodes, 83 compared to 31%, had mothers using opiates, including propoxyphene, for postpartum analgesia. The mean number of doses taken was also higher with mothers of affected newborns taking a mean of 10 doses (range 4 to 22) compared to 5 doses (range 1 to 13) in the control group.[4]

A fullterm breastfed infant had mild hypotonia and nursing poorly at 10 days of age; the infant had not regained her birth weight by this time. Seven days later, the mother had less milk and stopped nursing. The infant's mother had been prescribed 6 capsules daily of propoxyphene 30 mg plus acetaminophen 500 mg for the first 10 days postpartum. Hair samples from the infant were positive for propoxyphene and norpropoxyphene and were higher than the mother's hair sample concentrations.[3] Propoxyphene was probably the cause of the adverse reactions in the infant.

All adverse reactions in breastfed infants reported in France between January 1985 and June 2011 were compiled by a French pharmacovigilance center. Of 174 reports, propoxyphene was reported to cause adverse reactions in 11 infants and to be one of the drugs most often suspected in serious adverse reactions. Reactions included hypotonia, apnea, respiratory distress, bradycardia, constipation and weight loss.[5]

### Effects on Lactation and Breastmilk

Narcotics can increase serum prolactin.[6] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Hydromorphone, Ibuprofen, Morphine

### References

1 Kunka RL, Venkataramanan R, Stern RM, et al. Excretion of propoxyphene and norpropoxyphene in breast milk. Clin Pharmacol Ther 1984;35:675–80.6713779
2 Kunka RL, Yong CL, Ladik CF, et al. Liquid chromatographic determination of propoxyphene and norpropoxyphene in plasma and breast milk. J Pharm Sci 1985;74:103–4.3981406
3 Rigourd V, Amirouche A, Tasseau A, et al. Retrospective diagnosis of an adverse drug reaction in a breastfed neonate: Liquid chromatography-tandem mass spectrometry quantification of dextropropoxyphene and norpropoxyphene in newborn and maternal hair. J Anal Toxicol 2008;32:787–9.19021937
4 Naumburg EG, Meny RG. Breast milk opioids and neonatal apnea. Am J Dis Child 1988;142:11–2.3341293
5 Soussan C, Gouraud A, Portolan G, et al. Drug-induced adverse reactions via breastfeeding: A descriptive study in the French Pharmacovigilance Database. Eur J Clin Pharmacol 2014;70:1361–6.25183382
6 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200–3.263291

## Substance Identification

### Substance Name

Propoxyphene

### CAS Registry Number

469-62-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics